# Ethyl Loflazepate

CASRN: 29177-84-2

## Drug Levels and Effects

### Summary of Use during Lactation

Ethyl loflazepate is not approved for marketing in the United States by the U.S. Food and Drug Administration. Available data indicate that the infant dose from milk might be rather high. An alternate drug with more published data and lower milk levels is preferred, especially while nursing a newborn or preterm infant. If ethyl loflazepate is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Ethyl loflazepate is immediately and completely metabolized to an unstable metabolite after intestinal absorption, then it is metabolized to the active metabolite, norfludiazepam (CM7116).

Maternal Levels. Two women who were taking ethyl loflazepate orally donated milk samples between 3 and 6 days postpartum at 1 hour after a dose at the estimated peak serum concentration and just before a dose. One woman who was taking a dose of 0.5 mg daily had a 1-hour milk level of norfludiazepam of 6.55 mcg/L and a trough milk level of 8.1 mcg/L. The other woman was taking a dose of 1 mg daily. She had a 1-hour milk level of norfludiazepam of 13.6 mcg/l and a trough milk level of 11.4 mcg/L. The authors estimated that the estimated relative infant dose of ethyl loflazepate would be 12.4 to 12.9%.[1]

At one day postpartum, a mother began ethyl loflazepate 1 mg daily, sertraline 50 mg daily and continued alprazolam 0.4 mg daily. Two breastmilk samples on day 3 postpartum contained 7.8 and 10.6 mcg/L of norfludiazepam (CM7116; desalkylflurazepam). The sample that contained 7.8 mcg/L was taken at 22.6 hours after the dose. Two samples on day 4 postpartum contained 8.7 and 9.1 mcg/L and one sample on day 6 postpartum contained 13.4 mcg/L, which was taken at 0.5 hours after the dose. Using the highest measured milk level of 13.4 mcg/L, the estimated dose of norfludiazepam would be 2 mcg/kg daily.[2] Using this value, the daily dose of ethyl loflazepate would be 2.5 mcg/kg, which is a relative infant dose of 13.7% of the maternal weight-adjusted dosage.

Infant Levels. A mother who was partially nursing her infant (daily milk intake 80 to 200 mL of pumped breastmilk and 100 to 200 mL of formula) was taking ethyl loflazepate 1 mg daily. The cord blood level of norfludiazepam on the day of delivery was 53.1 mcg/L and on day 5 postpartum, the infant had a serum concentration of 32.1 mcg/L of norfludiazepam.[2]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lorazepam, Oxazepam, Temazepam

### References

1 Nishimura A, Furugen A, Umazume T, et al. Benzodiazepine concentrations in the breast milk and plasma of nursing mothers: Estimation of relative infant dose. Breastfeed Med 2021;16:424-31.33449825
2 Saito J, Tachibana Y, Wada YS, et al. Transfer of ethyl loflazepate into cord blood, breast milk, and infant's serum: A case report. J Clin Psychopharmacol 2022;42:416-8.35343929

## Substance Identification

### Substance Name

Ethyl Loflazepate

### CAS Registry Number

29177-84-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines